# Molnupiravir

CASRN: 2492423-29-5

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of molnupiravir during breastfeeding. Breastfeeding is not recommended during treatment and for 4 days after the last dose of molnupiravir.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Nirmatrelvir, Remdesevir

## Substance Identification

### Substance Name

Molnupiravir

### CAS Registry Number

2492423-29-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiviral Agents

Nucleosides